# Fesoterodine

CASRN: 286930-02-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of fesoterodine during breastfeeding. Long-term use of fesoterodine might reduce milk production or milk letdown. During long-term use, observe for signs of decreased lactation (e.g., insatiety, poor weight gain).

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. Anticholinergics can inhibit lactation in animals apparently by inhibiting growth hormone and oxytocin secretion.[1-5] Anticholinergic drugs can also reduce serum prolactin in nonnursing women.[6] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Aaron DK, Ely DG, Deweese WP, et al. (1997). Reducing milk production in ewes at weaning using restricted feeding and methscopolamine bromide. J Anim Sci.
2 Powell MR, Keisler DH. (1995). A potential strategy for decreasing milk production in the ewe at weaning using a growth hormone release blocker. J Anim Sci.
3 Daniel JA, Thomas MG, Powell MR, et al. (1997). Methscopolamine bromide blocks hypothalmic-stimulated release of growth hormone in ewes. J Anim Sci.
4 Bizzarro A, Iannucci F, Tolino A, et al. (1980). Inhibiting effect of atropine on prolactin blood levels after stimulation with TRH. Clin Exp Obstet Gynecol.
5 Svennersten K, Nelson L, Juvnäs-Moberg K. (1992). Atropinization decreases oxytocin secretion in dairy cows. Acta Physiol Scand.
6 Masala A, Alagna S, Devilla L, et al. (1982). Muscarinic receptor blockade by pirenzepine: Effect on prolactin secretion in man. J Endocrinol Invest.

## Substance Identification

### Substance Name

Fesoterodine

### CAS Registry Number

286930-02-7

### Drug Class

Breast Feeding

Lactation

Muscarinic Antagonists

Parasympatholytics